# Domperidone

CASRN: 57808-66-9

## Drug Levels and Effects

### Summary of Use during Lactation

Domperidone is not approved for marketing in the United States by the U.S. Food and Drug Administration (FDA) but is available in other countries. Domperidone may also be available from some compounding pharmacies and via the internet in the US. The quality of such products cannot be assured, and the FDA has warned against their use.[1]

Data available from 4 small studies on the excretion of domperidone into breastmilk are inconsistent, but infants would probably receive less than 0.1% of the maternal weight-adjusted dosage, even at high maternal doses. No adverse effects have been found in a limited number of published cases of breastfed infants whose mothers were taking domperidone.

Domperidone is sometimes used as a galactogogue to increase milk supply.[2,3] and has been used in induced lactation after surrogacy and by adoptive and transgender women.[4-13] Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[14,15] Most mothers who are provided instruction in good breastfeeding technique and breastfeed frequently are unlikely to obtain much additional benefit from domperidone. Several meta-analyses of domperidone use as a galactogogue in mothers of preterm infants concluded that domperidone can increase milk production acutely in the range of 90 to 94 mL daily.[3,16,17] The most recent and largest meta-analysis concluded that domperidone is more effective than placebo as a galactogogue, but only in the mothers of preterm infants and that 30 mg daily for 7 days is the optimal dose.[18] Other reviewers concluded that improvement of breastfeeding practices seems more effective and safer than off-label use of domperidone.[19,20] One retrospective study found that breastmilk feeding rates at discharge remained consistently lower in very preterm (<32 weeks gestation) infants of women dispensed domperidone than those who were not prescribed domperidone.[21]

Domperidone has no officially established dosage for increasing milk supply in any country. Most published studies have used domperidone in a dosage of 10 mg 3 times daily for 4 to 10 days. Two small studies found no statistically significant additional increase in milk output with a dosage of 20 mg 3 times daily compared to a dosage of 10 mg 3 times and that women who failed to respond to the low dosage did not respond to the higher dosage.[22,23] Dosages greater than 30 mg daily may increase the risk of arrhythmias and sudden cardiac death in patients receiving domperidone,[24] although some feel that the risk is less in nursing mothers because of their relatively younger age.[25] Large database retrospective cohort studies in Canada found an increase in the risk of cardiac arrhythmias and sudden cardiac death, but some confounders make the results subject to question.[26,27] In one case, domperidone use uncovered congenital long QT syndrome in a woman who developed loss of consciousness, behavioral arrest, and jerking while taking domperidone.[28] Mothers with a history of cardiac arrhythmias should not receive domperidone and all mothers should be advised to stop taking domperidone and seek immediate medical attention if they experience signs or symptoms of an abnormal heart rate or rhythm while taking domperidone, including dizziness, palpitations, syncope or seizures.[24]

Maternal side effects of domperidone reported in galactogogue studies and cases reported to the FDA include dry mouth, headache, dizziness, nausea, abdominal cramping, diarrhea, palpitations malaise, and shortness of breath. Some of these were more frequent with dosages greater than with 30 mg daily.[22,23,29-31] Surveys of women taking domperidone for lactation enhancement found gastrointestinal symptoms, breast engorgement, weight gain, headache, dizziness, irritability, dry mouth and fatigue were the most common side effects reported.[32-34] One mother taking domperidone 20 mg three times daily as a galactogogue for feeding her adoptive daughter developed obsessional thoughts with thoughts of killing her daughter. Stopping domperidone and instituting duloxetine therapy resulted in remission over a 10-month period.[35] A retrospective review of medical records in Ontario, Canada found no association of domperidone with new-onset psychosis, emergency department visits or hospital admissions with mental health diagnoses.[36]

Canadian health authorities found an association between the abrupt discontinuation or tapering of domperidone used for lactation stimulation and the development of psychiatric adverse events.[37] Canadian labeling warns against use of domperidone doses greater than 30 mg daily for longer than 4 weeks. Numerous cases of withdrawal symptoms, such as anxiety, depression, panic attacks, sleep disturbances, palpitations, and gastrointestinal disturbances, after discontinuation with long-term or high-dose use have been reported, with detoxification requiring weeks to months of slow tapering of the dosage.[38-44]

### Drug Levels

Maternal Levels. Thirty breastmilk samples were obtained from 6 mothers taking domperidone 10 mg 3 times daily and 28 milk samples were obtained from 5 mothers taking domperidone 20 mg 3 times daily. The average concentrations of the drug in breastmilk were 0.28 mcg/L with the lower dosage and 0.49 mcg/L with the higher dosage. The authors estimated that a fully breastfed infant would receive daily dosages of 0.04 and 0.07 mcg/kg daily, respectively, at these maternal dosages. The estimated weight-adjusted maternal dosages were 0.012% and 0.009%, respectively.[22]

A double-blind, controlled trial compared two dosages of domperidone for increasing milk supply in mothers of preterm infants. Mothers took either 10 mg or 20 mg three times daily. Drug concentrations in breastmilk were measured once between days 10 and 15 three hours after a dose. Milk domperidone concentrations were 3.4 mcg/L with the 10 mg dose (n = 4) and 6.9 mcg/L with the 20 mg dose (n = 3).[23]

A woman was taking domperidone 40 mg 4 times daily for 7 months to enhance milk production. She submitted 5 milk samples over a 24-hour period for analysis. Using the average of the concentration values resulted in an estimated daily infant dosage of 1 mcg/kg and a relative infant dose of 0.05%. Using the highest value of 8.4 mcg/L, the RID was 0.06%.[45]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One paper reported 2 studies. In one, 8 women received domperidone 10 mg 3 times daily from day 2 to 5 postpartum. In the other, 9 women received domperidone 10 mg 3 times daily for 10 days from week 2 postpartum. No side effects were reported in any of the breastfed (extent not stated) infants.[46,47]

Eleven women took domperidone 10 mg 3 times daily for 7 days to increase the supply of pumped milk for their preterm neonates. No side effects were reported in their infants.[48]

In a study of 90 mothers who received domperidone 10 mg three times daily for 2 or 4 weeks while providing milk for their preterm infants, there was no apparent difference in the frequency or types of adverse events that occurred in their infants, whether taking the active drug or placebo.[49]

A transgender woman took and spironolactone 50 mg twice daily to suppress testosterone, domperidone 10 mg three times daily, increasing to 20 mg four times daily, oral micronized progesterone 200 mg daily and oral estradiol to 8 mg daily and pumped her breasts 6 times daily to induce lactation. After 3 months of treatment, the estradiol regimen was changed to a 0.025 mg daily patch, and the progesterone dose was lowered to 100 mg daily. Two weeks later, she began exclusively breastfeeding the newborn of her partner. Breastfeeding was exclusive for 6 weeks, during which the infant’s growth, development and bowel habits were normal. The patient continued to partially breastfeed the infant for at least 6 months.[4]

A transgender woman was taking spironolactone 100 mg twice daily, progesterone 200 mg daily and estradiol 5 mg daily. She started on domperidone 10 mg three times daily to increase milk supply. She was able to pump 3 to 5 ounces of milk daily one month after starting. The dose of domperidone was increased to 30 mg three times daily after 8 weeks because of a decreased milk supply. Her milk supply returned to 3 to 5 ounces of milk daily. By 6 months, her milk supply had decreased to about 5 mL daily, even though her serum prolactin was still elevated.[50]

A transgender woman had been taking estradiol 2 mg twice daily for 14 years. She began taking domperidone 10 mg four times daily and progesterone 100 mg daily 107 days prior to her partner’s due date. At the same time, the estradiol dosage was increased to 4 mg twice daily. At 94 days prior to the due date, the domperidone dosage was increased to 20 mg four times daily, the progesterone dose was increased to 200 mg daily and estrogen was changed to transdermal estradiol 25 mcg daily. Progesterone was discontinued 34 days prior to the due date. She pumped and stored milk beginning 34 days prior to the due date and by 27 days postpartum, she was breastfeeding the infant twice daily, expressing 150 mL of milk daily and was able to decrease the domperidone dosage to 20 mg three times daily. Lower dosages reduced milk supply.[7]

### Effects on Lactation and Breastmilk

Domperidone increases serum prolactin in lactating and nonlactating women.[22,51-53] This effect is thought to be caused by the drug’s antidopaminergic effect. In nonpregnant women, domperidone is less effective than the same dose of oral metoclopramide in raising serum prolactin; however, in multiparous women their effects are similar.[51,53] Domperidone has caused galactorrhea in nonpregnant women and in one male, nonbreastfed infant.[54-61]

One paper, which was published twice in 2 different journals,[46,47] reported two separate small studies. In the first study, 15 women with a history of defective lactogenesis were given either oral domperidone 10 mg (n = 8) or placebo (n = 7) 3 times daily from day 2 to 5 postpartum. The patients were apparently not randomized, and blinding was not mentioned in the paper. No instruction or support in breastfeeding technique was provided. The groups had similar serum prolactin levels at the start of the study. Baseline serum prolactin levels were higher in the treated women from day 3 to 5 postpartum. Suckling-induced serum prolactin increases were higher in the treated women than in the placebo group from day 2 postpartum onward. Milk yield was calculated by weighing the infants before and after each nursing for 24 hours. Increase in milk yield were greater in the treated mothers from day 2 onward; however, the lower average milk yield in the placebo group was due to 3 women with very low milk output. Average infant weight gain was correspondingly greater in the treated group. At 1 month postpartum, all treated mothers were nursing well, but 5 of 7 untreated mothers had inadequate (not defined) lactation. No correlation was found between baseline serum prolactin or the increase in prolactin and milk production.

In the same paper(s), 17 primiparous women who had insufficient lactation (30% below normal) at 2 weeks postpartum were studied using the same methodology as above. Mothers were given either oral domperidone 10 mg (n = 9) or placebo (n = 8) 3 times daily for 10 days. The groups did not have significantly different serum prolactin levels at the start of the study. Serum prolactin levels were higher in the treated than untreated women from day 2 onward and milk production was higher in the treated group from day 4 onward. At the end of the study no untreated woman had an increase in milk supply from day 1. One month after the beginning of the study, all treated women had adequate milk production. No correlation was found between serum prolactin and milk production.[46]

One well-designed, but small trial was reported with domperidone. Twenty women who were pumping milk with a good quality electric pump for their preterm infants were given either oral domperidone 10 mg (n = 11) or placebo (n = 9) 3 times daily for 7 days in a randomized, double-blind, trial. The mothers averaged 32 to 33 days postpartum. All had failed to produce sufficient milk for their infants after extensive counseling by lactation consultants. By day 5 of therapy, the serum prolactin levels of the treated mothers had increased by 119 mcg/L in the treated group compared to 18 mcg/L in the placebo group. Serum prolactin decreased to baseline levels in both groups 3 days after discontinuation of the study medications. Although the (partially imputed) baseline milk production was greater in the domperidone group (113 mL daily) than in the placebo group (48 mL daily), the average daily increases in milk production on days 2 to 7 were 45% (to 184 mL) and 17% (to 66 mL) in the domperidone and placebo groups, respectively. However, 4 women in the domperidone group failed to complete the study and only the study completers were matched and found to be similar at baseline. No follow-up beyond the 7-day study period was done to evaluate the persistence of an effect of domperidone on lactation success.[48] While this study appears to offer evidence of a beneficial effect on the milk supply in the mothers of preterm infants who are pumping their milk, several factors make this conclusion questionable: a 36% drop-out rate in the active drug group, the lack of an intent-to-treat analysis, and the vast difference in baseline milk supply between the domperidone and placebo groups.

Twenty-five women who had been given domperidone 20 mg 4 times daily to increase milk supply had their dosages decreased over 2 to 4 weeks and discontinued. The duration of domperidone use was not stated in the abstract. All women had stable milk output and were nursing infants under 3 months of age who were growing normally. Of the 25 women, 23 did not increase their use of formula and all infants grew normally, indicating that domperidone can be withdrawn without a detrimental effect on infant nutrition.[62]

Six women who were unable to produce sufficient milk for their preterm infants after counseling by lactation consultants were given domperidone in dosages of 10 mg 3 times daily or 20 mg 3 times daily in a crossover fashion. Baseline serum prolactin concentrations were increased by both dosages to a similar extent. Milk production increased in only 4 of the 6 women. In the other 4 women, milk production increased from 8.7 g/hour at baseline to 23.6 g/hour with 30 mg daily and 29.4 g/hour with 60 mg daily, although there was no statistically significant difference in between the 2 dosages. Side effects in the mothers of dry mouth, abdominal cramping and headache were more frequent with the higher dosage. Severe abdominal cramping caused one mother to drop out of the study during the run-in phase. Additionally, constipation and depressed mood were reported at the higher dosage.[22]

Mothers of preterm infants (<31 weeks) with insufficient milk supply were given either domperidone 10 mg orally 3 times daily or placebo in a randomized, double-blind study. Women who received domperidone had a greater increase in milk volume (+267%) than in the placebo group (19%) at the end of 14 days. Breastmilk calcium concentration increased in the domperidone group (+62%) and decreased (−4%) in the placebo group. Carbohydrate concentrations increased slightly in the mothers receiving domperidone (+2.7%) and decreased slightly (−2.7%) in those receiving placebo. No statistical differences were found in protein, energy, fat, sodium or phosphate concentrations between the groups.[63]

A retrospective, uncontrolled case series reported 14 mothers of preterm infants in the intensive care unit who had been given domperidone 20 mg three times daily to increase their milk supply. The pumped volume of milk increased by 48% over 14 days. However, the lack of a control group renders this report uninterpretable.[64]

Mothers who underwent cesarean section at term were randomized to receive either oral domperidone 10 mg (n = 22) or placebo (n = 23) 4 times daily in a double-blind fashion beginning within the 24 hours postpartum. Nurses collected the mothers’ milk with an electric breast pump applied for 15 minutes twice daily 2 hours after the mothers nursed their infants. The volume of milk collected by this incomplete collection technique was greater at all times, including at baseline, in the domperidone group. Seven women in the domperidone group reported dry mouth, and none in the placebo group.[29] Because of the endpoint selected and inequalities at baseline, it is impossible to attribute any clinical relevance to these results.

Mothers who were expressing milk for their infants in a neonatal intensive care unit (mean gestational age 28 weeks) were given instructions on methods for increasing milk supply. If they were producing less than 160 mL of milk per kg of infant weight daily after several days, mothers were randomized to receive either domperidone or metoclopramide 10 mg by mouth 3 times daily for 10 days in a double-blinded fashion. Thirty-one mothers who received domperidone and 34 who received metoclopramide provided data on daily milk volumes during the 10 days. Milk volumes increased over the 10-day period by 96% with domperidone and 94% with metoclopramide, which was not statistically different between the groups. Some mothers continued to measure milk output after the end of the medication period. Results were similar between the 2 groups. Side effects in the domperidone group (3 women) included headache, diarrhea, mood swings and dizziness. Side effects in the metoclopramide group (7 women) included headache (3 women), diarrhea, mood swings, changed appetite, dry mouth and discomfort in the breasts.[30] The lack of a placebo group and the projection of milk volumes to impute missing data from some mothers detract from the findings of this study.

A double-blind, controlled trial compared two dosages of domperidone for increasing milk supply in mothers of preterm infants. Mothers received either 10 mg (n = 8) or 20 mg (n = 7) three times daily for 4 weeks, followed by a tapering dosage over the subsequent 2 weeks. Both dosages increased milk volume, but there was no statistically significant different in milk volumes between the two groups.[23]

A randomized trial in Pakistan compared the effects of domperidone 10 mg to placebo 3 times daily in women who delivered at term and had 10 mL or less of milk production from both breasts per single expression on day 6 postpartum. All women were given some counseling about proper breastfeeding technique. After 7 days of drug or placebo use, women were categorized as having either 50 mL or greater milk production per single expression or less than 50 mL. Serum prolactin was not measured. Seventy-two percent of women given domperidone successfully increased their milk supply compared to 11% in the placebo group. Problems with the study included an apparent lack of blinding of the drugs, investigators and mothers as well as the questionable endpoint of a single expression at an uncontrolled time of day rather than a daily total of milk output.[65]

A retrospective study compared mothers of hospitalized preterm infants who took domperidone (n = 45) to those who did not because of its cost (n = 50). After treatment using a standard protocol, the treated mothers showed an increase in milk supply from 125 mL daily to 415 mL daily after 30 days of treatment. Untreated mothers had a decrease in milk supply from 158 mL daily to 88 mL daily after 30 days.[66,67]

A randomized trial of domperidone (dosage not stated) in India for 7 to 14 days in 32 mothers with insufficient milk production whose infants were in a neonatal ICU found that milk output increased more (186 mL) with domperidone than with placebo (70 mL) after 7 days of therapy. There were no differences in serum prolactin between the domperidone and placebo groups on days 1 and 8 of therapy. There was also no difference in weight gain of the infants between the two groups.[68]

A randomized trial of domperidone 10 mg three times daily in Indonesia for 10 days in 50 mothers with preterm infants and insufficient milk production after 7 days of lactation counseling found that milk output increased more (182 mL) with domperidone than with placebo (72 mL) after 7 days of therapy. The increased milk volume persisted at day 10, three days after drug discontinuation.[69]

A randomized, double-blind study in a hospital in Thailand gave placebo (n = 25) or domperidone 10 mg three time daily (n = 25) for 4 days to mothers who had a normal vaginal delivery of a full-term infant beginning 24 hours postpartum. Milk volumes from a single manual expression were greater at 48 hours postpartum (placebo 3 mL, domperidone 8 mL), 72 hours postpartum (placebo 10 mL, domperidone 15 mL) and 96 hours postpartum (placebo 15 mL, domperidone 35 mL). No follow-up of milk supply or infant outcomes was performed.[70]

In a double-blind, multicenter study, mothers of preterm infants received either domperidone 10 mg 3 times daily for 28 days or placebo three times daily for 14 days followed by domperidone 10 mg 3 times daily for 14 days. Only mothers with documented low milk production were entered into the trial and breastfeeding support was provided to all mothers. Seventy-eight percent of mothers who received domperidone in the first 2 weeks had a 50% increase in milk supply compared to 58% who received placebo (odds ratio 2.56). At the end of 4 weeks, the values were 69% and 62%, but the difference was not statistically significant. At 6 weeks post term gestation, there was no appreciable difference between the groups in the numbers of mothers providing milk to their infants or supplementing with formula. The authors concluded that domperidone supported more mothers to increase their milk volume as early as 8 to 21 days postdelivery; however, the gain in volume was modest.[49] In a secondary analysis of study results, the authors found no difference in response between mothers of infants born between 23 and 26 weeks of gestation and mothers of infants born between 27 and 29 weeks of gestation.[71] Other secondary analyses of the data found no difference in outcome regardless of whether domperidone was started during the period of days 8 to 14 or days 15 to 21 postpartum.[72,73] Mothers with initial volumes of milk of 200 mL/day or less had the greatest percentage of increase in milk volume, but those with initial milk volumes of 100 mL/day or less had continuing low absolute milk volumes.[74]

Women were retrospectively studied following the birth of preterm infants of 30 weeks or less gestational age. Overall, those who received domperidone for lactation enhancement during postpartum hospitalization (n = 84) were no more likely to be nursing their infants at the time of infant discharge from the neonatal unit than mothers who did not receive domperidone (n = 114). However, among mothers weighing 70 kg or more, the use of domperidone was associated with a lower likelihood of breastfeeding on discharge.[75]

A meta-analysis of studies on domperidone use as a galactogogue in the mothers of preterm infants found 5 studies with 95 mothers randomized to domperidone and 97 to placebo. All studies used a dose of 10 mg three times daily for a duration of 5 to 14 days. The results found that domperidone use resulted in an average increase of 88 mL daily with a 95% CI of 57 to 120 mL daily.[3]

A meta-analysis of studies on domperidone use as a galactogogue in mothers who expressed their milk found 5 studies with 120 mothers randomized to domperidone and 125 to placebo. Three of the studies comprising 73 mothers randomized to domperidone and 77 randomized to placebo were included in the previously published meta-analysis ([20]). Four studies used a dose of 10 mg three times daily for a duration of 7 to 14 days, and one used 10 mg four times daily for 4 days. The results found that domperidone use resulted in an average increase of 94 mL daily with a 95% CI of 71 to 117 mL daily. A subanalysis found that using domperidone longer than 7 days provided no additional benefit in increased milk output.[16]

A study of 10 mothers of preterm infants in the neonatal intensive care unit were administered domperidone 10 mg three times daily if their milk production was either less than 300 mL or 160 mL/kg infant body weight daily after 2 weeks postpartum. The median daily milk volume was 60 mL (range 2 to 310 mL) initially and 176 mL (range 11 to 400 mL) on the 14th day. Seven of the 10 mothers had an increase in milk volume to more than 1.5 times their initial volume or greater. The median serum prolactin concentration was 46 mcg/L (range 4 to 128) before administration and 167 mcg/L (range 59 to 356) on the 14th day after administration. There was no correlation between serum prolactin and milk production and 3 mothers with elevated prolactin did not produce additional milk.[76]

A randomized study of women (n = 20 in each group) who were mixed feeding their infants in the first month postpartum compared 12 sessions of electroacupuncture or low-level laser therapy to the breast over 1 month and control women. All women also received oral domperidone 10 mg three times daily. Both laser therapy and electroacupuncture increased serum prolactin, infant weight and maternal perception of milk production more than domperidone alone.[77]

A randomized, double-blind trial compared domperidone to placebo in mothers with insufficient milk supply and sick neonates. Of 166 women eligible for the study, 72% of mothers were able to increase their milk production without pharmacological treatment with counseling. Ultimately, 24 women received domperidone 20 mg three times daily for 14 days and 23 received placebo. After 7 days of therapy, the prolactin levels increased from 72.85 mcg/L to 223.4 mcg/L in the domperidone group and from 42.33 mcg/L to 60.08 mcg/L. Milk daily production increased from 156 mL to 401 mL in the domperidone group, and from 176 mL to 261 mL in the placebo group. Ninety-five percent of infants in the domperidone group were breastfeeding at discharge compared to 52% in the placebo group. All differences between groups were statistically significant.[78]

A woman with complete androgen insensitivity syndrome became a mother through surrogacy. To breastfeed her infant, she was treated with a topical estrogen patch, domperidone 20 mg 3 times daily and mechanical breast stimulation starting 4 weeks before delivery. At delivery, the estrogen patch was discontinued. The patient was able to partially breastfeed her infant for 1 month.[5]

In a survey of nursing mothers in Australia, 355 mothers were taking domperidone as a galactogogue. On average, mothers rated domperidone as slightly more than “moderately effective” on a Likert scale. Forty-five percent of mothers taking domperidone reported experiencing adverse reactions, most commonly weight gain, headache, dry mouth, and fatigue. Nine percent of women stopped the drug because of side effects.[33,34]

Mothers who had undergone lower-segment cesarean section delivery at or near term and felt that their milk production was inadequate were randomized to receive domperidone 10 mg (n = 183) or placebo (n = 183) three times a day for 3 days. All were shown a 5-minute video on the benefits of breastfeeding. Per protocol analysis found that the rate of exclusive breastfeeding at 7 days was greater in the domperidone group compared to placebo (96% vs 86%). Exclusive breastfeeding rates at 3 and 6 months were numerically, but not statistically greater in the domperidone group. Infant weight gain was no different between the groups and 6, 10 and 14 weeks and 9 months postpartum.[79]

A transgender woman was pumping milk and partly breastfeeding her partner’s infant. Pooled 24-hour milk samples were analyzed about monthly beginning at 56 days before delivery. The participant’s milk had values of protein, fat, lactose, and calorie content at or above those of standard term milk.[7]

A transgender woman was taking sublingual estradiol 4 mg twice daily, spironolactone 100 mg twice daily and progesterone 200 mg at bedtime for gender-affirming therapy. To prepare for the birth of the infant being carried by her partner, sublingual estradiol was increased to 6 mg twice daily and progesterone was increased to 400 mg at bedtime. Domperidone 10 mg twice daily was also started to increase serum prolactin levels and later increased to 20 mg 4 times daily. Before the delivery date, progesterone was stopped, spironolactone was decreased to 100 mg daily and estradiol was changed to 25 mcg per day transdermally. At day 59 postpartum, estradiol was changed to 2 mg per day sublingually and spironolactone was increased to 100 mg twice daily. The patient was able to produce up to 240 mL of milk daily containing typical macronutrient and oligosaccharide levels.[8]

A randomized study of women who delivered a single infant vaginally compared domperidone 10 mg to the Thai herbal product, Plook-Fire-Thatu and placebo, each given three times daily starting on the first day postpartum. Plook-Fire-Thatu contains several herbs from the genus Piper (pepper) and piperine may be the active ingredient. Piperine also enhances the bioavailability of some chemicals. Ginger, which is a purported galactogogue, is also included in the formula. Milk output was measured by test weighing infants three times daily. On day 3 of treatment, the herbal product resulted in a greater increase in milk production than placebo or domperidone, but there was no difference in infant weights between groups. Maternal temperatures were greater in the herbal group, which is in accord with the Chinese theory of increasing heat to improve lactation.[80]

A transgender woman who wished to breastfeed was given estradiol transdermal patch 150 mcg daily and progesterone 100 mg daily by mouth. Later estradiol spray 100 mcg and domperidone 10 mg 4 times daily were added. Domperidone dosage was then doubled to 20 mg 4 times daily and progesterone was doubled to 100 mg twice daily. After further adjustment of estradiol and progesterone dosages, 7 mL of milk was produced with pumping, but 2 weeks after the infant’s birth, lactation induction was discontinued at the patient’s request.[11]

A 50-year-old transgender woman wished to breastfeed the expected infant of her partner. She was given domperidone in dosages increasing from 30 mg to 80 mg daily along with estradiol and progesterone to stimulate lactation. The patient was able to produce small quantities of milk and was able to directly breastfeed the infant.[10]

### References

1 Anon. FDA warns against women using unapproved drug, domperidone, to increase milk production. FDA Talk Paper 2004 http://www.fda.gov/Drugs/DrugSafety/InformationbyDrugClass/ucm173886.htm. Accessed October 10, 2012
2 Winterfeld U, Meyer Y, Panchaud A, . Management of deficient lactation in Switzerland and Canada: A survey of midwives’ current practices. Breastfeed Med 2012;7:317-8.22224508
3 Grzeskowiak LE, Smithers LG, Amir LH, . Domperidone for increasing breast milk volume in mothers expressing breast milk for their preterm infants: A systematic review and meta-analysis. BJOG 2018;125:1371-8.29469929
4 Reisman T, Goldstein Z. Case report: Induced lactation in a transgender woman. Transgend Health 2018;3:24-6.29372185
5 LeCain M, Fraterrigo G, Drake WM. Induced lactation in a mother through surrogacy with complete androgen insensitivity syndrome (CAIS). J Hum Lact 2020;36:791-4.31895601
6 Glover K, Casey JJ, Gilbert M. Case report: Induced lactation in an adoptive parent. Am Fam Physician 2023;107:119-20.36791458
7 Weimer AK. Lactation induction in a transgender woman: Macronutrient analysis and patient perspectives. J Hum Lact 2023;39:488-94.37138506
8 Delgado D, Stellwagen L, McCune S, . Experience of induced lactation in a transgender woman: Analysis of human milk and a suggested protocol. Breastfeed Med 2023;18:888-93.37910800
9 Al-Mohsen ZA, Frookh Jamal H. Induction of lactation after adoption in a muslim mother with history of breast cancer: A case study. J Hum Lact 2021;37:194-9.33275500
10 Ikebukuro S, Tanaka M, Kaneko M, . Induced lactation in a transgender woman: Case report. Int Breastfeed J 2024;19:66.39300546
11 van Amesfoort JE, Van Mello NM, van Genugten R. Lactation induction in a transgender woman: Case report and recommendations for clinical practice. Int Breastfeed J 2024;19:18.38462609
12 Marandi SA, Zanjani NE, Ravari M, . Induced lactation in non-gestational mothers in iran: Outcomes and predictors of breastfeeding success. Arch Iran Med 2025;28:135-9. doi:10.34172/aim.33516 40298005
13 Horak M, DeLeon L. Lactation induction in a transgender woman with electrocardiogram abnormalities. J Hum Lact 2026:8903344261464897.
14 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
15 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531
16 Taylor A, Logan G, Twells L, . Human milk expression after domperidone treatment in postpartum women: A systematic review and meta-analysis of randomized controlled trials. J Hum Lact 2019;35:501-9.30481478
17 Shen Q, Khan KS, Du MC, . Efficacy and safety of domperidone and metoclopramide in breastfeeding: A systematic review and meta-analysis. Breastfeed Med 2021;16:516-29.33769844
18 Si S, Zhao G, Song G, . Efficacy and safety of domperidone and metoclopramide on human milk production in postpartum mothers: A bayesian network meta-analysis of randomized controlled trials. BMC Pregnancy Childbirth 2024;24:819.39695450
19 Anderson PO, Valdés V. A critical review of pharmaceutical galactagogues. Breastfeed Med 2007;2:229-42.18081460
20 Paul C, Zenut M, Dorut A, . Use of domperidone as a galactagogue drug: A systematic review of the benefit-risk ratio. J Hum Lact 2015;31:57-63.25475074
21 McBride GMcK, Rumbold AR, Keir AK, . Longitudinal trends in domperidone dispensing to mothers of very preterm infants and its association with breast milk feeding at infant discharge: A retrospective study. BMJ Paediatr Open 2023;7:e002195.
22 Wan EW, Davey K, Page-Sharp M, . Dose-effect study of domperidone as a galactagogue in preterm mothers with insufficient milk supply, and its transfer into milk. Br J Clin Pharmacol 2008;66:283-9.18507654
23 Knoppert DC, Page A, Warren J, . The effect of two different domperidone dosages on maternal milk production. J Hum Lact 2013;29:38-44.22554679
24 Health Canada endorsed important safety information on domperidone maleate. [Accessed October 10, 2012]. 2012 http://www.hc-sc.gc.ca/dhp-mps/medeff/advisories-avis/prof/_2012/domperidone_hpc-cps-eng.php.
25 Bozzo P, Koren G, Ito S. Health Canada advisory on domperidone: Should I avoid prescribing domperidone to women to increase milk production? Can Fam Physician 2012;58:952-3.22972723
26 Smolina K, Mintzes B, Hanley GE, . The association between domperidone and ventricular arrhythmia in the postpartum period. Pharmacoepidemiol Drug Saf 2016;25:1210-4.27296864
27 Moriello C, Paterson JM, Reynier P, . Off-label postpartum use of domperidone in Canada: A multidatabase cohort study. CMAJ Open 2021;9:E500-E9.
28 Blusztein D, Peters S, Joshi S. Diagnosis of long QT syndrome triggered by domperidone use for breast-feeding. Heart Lung Circul 2017;26:S163. doi:10.1016/j.hlc.2017.06.274
29 Jantarasaengaram S, Sreewapa P. Effects of domperidone on augmentation of lactation following cesarean delivery at full term. Int J Gynaecol Obstet 2012;116:240-3.22189066
30 Ingram J, Taylor H, Churchill C, . Metoclopramide or domperidone for increasing maternal breast milk output: A randomised controlled trial. Arch Dis Child Fetal Neonatal Ed 2012;97:F241-5.22147287
31 Sewell CA, Chang CY, Chehab MM, . Domperidone for lactation: What health care providers need to know. Obstet Gynecol 2017;129:1054-8.28486375
32 Hale TW, Kendall-Tackett K, Cong Z. Domperidone versus metoclopramide: Self-reported side effects in a large sample of breastfeeding mothers who used these medications to increase milk production. Clin Lact (Amarillo) 2018;9:10-7. doi:10.1891/2158-0782.9.1.10
33 McBride GM, Stevenson R, Zizzo G, . Use and experiences of galactagogues while breastfeeding among Australian women. PLoS One 2021;16:e0254049.34197558
34 McBride GM, Stevenson R, Zizzo G, . Women’s experiences with using domperidone as a galactagogue to increase breast milk supply: An Australian cross-sectional survey. Int Breastfeed J 2023;18:11.36750944
35 Suain Bon R, Mahmud AA. Domperidone use as a galactagogue and infanticide ideation: A case report. Breastfeed Med 2022;17:698-701.35793516
36 Zipursky J, Garg R, Wang T, . Domperidone use in lactation and risk of severe postpartum mental health outcomes. Obstet Gynecol 2026;148:132-9.41380161
37 Health Canada. Domperidone and psychiatric withdrawal events when used off-label for lactation stimulation. Health Product InfoWatch 2023 https://www.canada.ca/en/health-canada/services/drugs-health-products/medeffect-canada/health-product-infowatch/august-2023.html#a3-1-1
38 Papastergiou J, Abdallah M, Tran A, . Domperidone withdrawal in a breastfeeding woman. Can Pharm J (Ott) 2013;146:210-2.23940477
39 Seeman MV. Transient psychosis in women on clomiphene, bromocriptine, domperidone and related endocrine drugs. Gynecol Endocrinol 2015;31:751-4.26291819
40 Doyle M, Grossman M. Case report: Domperidone use as a galactagogue resulting in withdrawal symptoms upon discontinuation. Arch Womens Ment Health 2018;21:461-3.29090362
41 Manzouri P, Mink M. Withdrawal effects from domperidone requiring prolonged tapering schedule. Pharmacotherapy 2017;37:e112. doi:10.1002/phar.2028
42 Sharma V, Sharma S, Doobay M. Domperidone withdrawal in a nursing female with pre-existing psychiatric illness: Case report. Curr Drug Saf 2022;17:278-80.34645378
43 Majdinasab E, Haque S, Stark A, . Psychiatric manifestations of withdrawal following domperidone used as a galactagogue. Breastfeed Med 2022;17:1018-24.36367713
44 Cottin J, Bertin B, Atzenhoffer M, . Domperidone withdrawal in breastfeeding women: A case report and a literature review. Fundam Clin Pharmacol 2025;39 (Suppl. 1):e70023.PS-142. doi:10.1111/fcp.70023
45 Krutsch K, Datta P. The transfer of domperidone into human milk remains low at high doses. Breastfeed Med 2023;18:555-6.37352416
46 De Leo V, Petraglia F, Sardelli S, . Use of domperidone in the induction and maintenance of maternal breast feeding. Minerva Ginecol 1986;38:311-5.3725173
47 Petraglia F, De Leo V, Sardelli S, . Domperidone in defective and insufficient lactation. Eur J Obstet Gynecol Reprod Biol 1985;19:281-7.3894101
48 da Silva OP, Knoppert DC, Angelini MM, . Effect of domperidone on milk production in mothers of premature newborns: A randomized, double-blind, placebo-controlled trial. CMAJ 2001;164:17-21.11202662
49 Asztalos EV, Campbell-Yeo M, da Silva OP, . Enhancing human milk production with domperidone in mothers of preterm infants. J Hum Lact 2017;33:181-7.28107101
50 Wamboldt R, Shuster S, Sidhu BS. Lactation induction in a transgender woman wanting to breastfeed: Case report. J Clin Endocrinol Metab 2021;106:e2047-e52.33513241
51 Brouwers JR, Assies J, Wiersinga WM, . Plasma prolactin levels after acute and subchronic oral administration of domperidone and of metoclopramide: A cross-over study in healthy volunteers. Clin Endocrinol (Oxf) 1980;12:435-40.7428183
52 Hofmeyr GJ, van Iddekinge B, Blott JA. Domperidone: Secretion in breast milk and effect on puerperal prolactin levels. Br J Obstet Gynaecol 1985;92:141-4.3882143
53 Brown TE, Fernándes PA, Grant LJ, . Effect of parity on pituitary prolactin response to metoclopramide and domperidone: Implications for the enhancement of lactation. J Soc Gynecol Investig 2000;7:65-9.
54 Poovathingal MA, Bhat R, Ramamoorthi. Domperidone induced galactorrhea: An unusual presentation of a common drug. Indian J Pharmacol 2013;45:307-8.23833383
55 Jabbar A, Khan R, Farrukh SN. Hyperprolactinaemia induced by proton pump inhibitor. J Pak Med Assoc 2010;60:689-90.20726208
56 Nijhawan S, Rai RR, Sharma CM. Domperidone induced galactorrhea. Indian J Gastroenterol 1991;10:113.
57 Demir AM, Kuloglu Z, Berberoglu M, . Euprolactinemic galactorrhea secondary to domperidone treatment. J Pediatr Endocrinol Metab 2015;28:955-6.25781524
58 De S, Taylor CM. Domperidone toxicity in an infant on maintenance haemodialysis. Pediatr Nephrol 2007;22:161-2.16960712
59 Yedla D, Sharmila V. Atypical presentation of domperidone-induced galactorrhea. Indian J Pharmacol 2022;54 381-2.36537410
60 Cann PA, Read NW, Holdsworth CD. Galactorrhoea as side effect of domperidone. Br Med J (Clin Res Ed) 1983;286:1395-6.
61 Prasad A, Agrawal S, Pradhan C, . Domperidone induced galactorrhoea in reproductive age group females-a case series. J Popul Ther Clin Pharmacol 2024;31:343-6. doi:10.53555/jptcp.v31i4.5458
62 Livingstone V, Blaga Stancheva, L, Stringer J. The effect of withdrawing domperidone on formula supplementation. Breastfeed Med 2007;2:178. doi:10.1089/bfm.2007.9985
63 Campbell-Yeo ML, Allen AC, Joseph KS, . Effect of domperidone on the composition of preterm human breast milk. Pediatrics 2010;125:e107-14.20008425
64 Wagner CL, Murphy PK, Haase B, . Domperidone in the treatment of low milk supply in mothers of critically ill neonates. Breastfeed Med 2011;6 (Suppl 1):S-21. doi:10.1089/bfm.2011.9985
65 Inam I, Navinés AB, Shahid A. A comparison of efficacy of domperidone and placebo among postnatal women with inadequate breast milk production. Pak J Med Health Sci 2013;7:314-6. https://pjmhsonline.com/2013/apr_june/
66 Haase B, Taylor S, Morella K, . Domperidone for treatment of low milk supply in mothers of hospitalized premature infants: A multidisciplinary development of safe prescribing guidelines and a retrospective chart review (2010-2014) of maternal response to treatment. Breastfeed Med 2016;11:A22. doi:10.1089/bfm.2016.28999.abstracts
67 Haase B, Taylor SN, Mauldin J, . Domperidone for treatment of low milk supply in breast pump-dependent mothers of hospitalized premature infants: A clinical protocol. J Hum Lact 2016;32:373-81.26905341
68 Rai R, Mishra N, Singh DK. Effect of domperidone in 2nd week postpartum on milk output in mothers of preterm infants. Indian J Pediatr 2016;83:894-5.27109392
69 Fazilla TE, Tjipta GD, Ali M, . Domperidone and maternal milk volume in mothers of premature newborns. Paediatr Indones 2017;57:18-22. doi:10.14238/pi57.1.2017.17-22
70 Wannapat M, Suthutvoravut S, Suwikrom S. Effectiveness of domperidone in augmenting breastmilk production measured by manual expression in postpartum women in Charoenkrung Pracharak Hospital. Ramathibodi Medical Journal 2018;41:17-26. https://he02.tci-thaijo.org/index.php/ramajournal/article/view/85234
71 Asztalos EV, Kiss A, da Silva OP, . Pregnancy gestation at delivery and breast milk production: A secondary analysis from the EMPOWER trial. Matern Health Neonatol Perinatol 2018;4:21.30410781
72 Asztalos EV, Kiss A, da Silva OP, . Evaluating the effect of a 14-day course of domperidone on breast milk production: A per-protocol analysis from the EMPOWER trial. Breastfeed Med 2019;14:102-7.30543461
73 Asztalos EV, Kiss A, da Silva OP, . Role of days postdelivery on breast milk production: A secondary analysis from the Empower trial. Int Breastfeed J 2019;14:21.31171928
74 Asztalos EV, Kiss A. Early breast milk volumes and response to galactogogue treatment. Children (Basel) 2022;9:1042.35884026
75 Grzeskowiak LE, Amir LH, Smithers LG. Longer-term breastfeeding outcomes associated with domperidone use for lactation differs according to maternal weight. Eur J Clin Pharmacol 2018;74:1071-5.29725699
76 Wada Y, Suyama F, Sasaki A, . Effects of domperidone in increasing milk production in mothers with insufficient lactation for infants in the neonatal intensive care unit. Breastfeed Med 2019;14:744-7.31483145
77 Maged AM, Hassanin ME, Kamal WM, . Effect of low-level laser therapy versus electroacupuncture on postnatal scanty milk secretion: A randomized controlled trial. Am J Perinatol 2020;37:1243-9.31327162
78 Khorana M, Wongsin P, Torbunsupachai R, . Effect of domperidone on breast milk production in mothers of sick neonates: A randomized, double-blinded, placebo-controlled trial. Breastfeed Med 2021;16:245-50.33202169
79 Archana A, Adhisivam B, Chaturvedula L, . Oral domperidone versus placebo for enhancing exclusive breastfeeding among post-lower segment cesarean section mothers - a double-blind randomized controlled trial. J Matern Fetal Neonatal Med 2023;36:2185754.36863712
80 Krungkraipetch K, Kwanchainon C. The use of Thai herbal galactogogue, ‘Plook-Fire-Thatu’, for postpartum heat re-balancing. Afr J Reprod Health 2023;27:85-98.37742337

## Substance Identification

### Substance Name

Domperidone

### CAS Registry Number

57808-66-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiemetics

Dopamine Antagonists

Galactogogues

Gastrointestinal Agents